# Tisagenlecleucel

CASRN: 1823078-37-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tisagenlecleucel during breastfeeding nor on breastfeeding after CAR-T cell therapy with tisagenlecleucel. However, some information on other agents indicates that breastfeeding might be acceptable after CAR-T cell therapy. If breastfeeding is attempted following tisagenlecleucel CAR T-cell therapy, infants should be monitored carefully, particularly with B- and T-cell counts and immunoglobulin (IgA, IgG and IgM) blood levels.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Axicabtagene Ciloleucel

## Substance Identification

### Substance Name

Tisagenlecleucel

### CAS Registry Number

1823078-37-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Immunotherapy, Adoptive

Antineoplastic Agents

Genetic Therapy